# Comfrey

CASRN: 84696-05-9

## Drug Levels and Effects

### Summary of Use during Lactation

Comfrey (Symphytum officinalis) herb and leaf contains allantoin and rosmarinic acid; comfrey also contains pyrrolizidine alkaloids. Comfrey preparations have been used topically for pain following episiotomy and cracked, painful nipples, either as aqueous preparations or in creams and ointments.[1-7] Scientific evidence of effectiveness for these indications is minimal. The pyrrolizidine alkaloids in comfrey can cause severe liver damage, liver cancer, mutagenicity, and even death.[8,9] For this reason, the U.S. Food and Drug Administration has banned the sale of oral comfrey products in the United States. Furthermore, most sources consider topical use of comfrey during breastfeeding to be contraindicated.[1,10] If it is used on the skin, it should only be applied to intact skin away from the breast on the smallest area of skin possible, and for a limited duration. It is particularly important to ensure that the infant not come into direct contact with the areas of skin that have been treated, because ingestion may cause severe liver damage.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Low Dog T. (2009). The use of botanicals during pregnancy and lactation. Altern Ther Health Med.
2 Petrie KA, Peck MR. (2000). Alternative medicine in maternity care. Prim Care.
3 Kopec K. (1999). Herbal medications and breastfeeding. J Hum Lact.
4 Allaire AD, Moos MK, Wells SR. (2000). Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol.
5 Dennehy C, Tsourounis C, Bui L, et al. (2010). The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs.
6 Yarnell E. (1997). Botanical medicine in pregnancy and lactation. Altern Complement Ther.
7 Fleiss P. Herbal remedies for the breastfeeding mother. Mothering 1988;Summer:68-71.
8 Panter KE, James LF. (1990). Natural plant toxicants in milk: A review. J Anim Sci.
9 Winship KA. (1991). Toxicity of comfrey. Adverse Drug React Toxicol Rev.
10 Howard CR, Lawrence RA. (1999). Drugs and breastfeeding. Clin Perinatol.

## Substance Identification

### Substance Name

Comfrey

### CAS Registry Number

84696-05-9

### Drug Class

Breast Feeding

Lactation

Anti-Inflammatory Agents

Complementary Therapies

Phytotherapy

Plants, Medicinal